# Zilucoplan

CASRN: 1841136-73-9

## Drug Levels and Effects

### Summary of Use during Lactation

Zilucoplan is expected to be degraded into small peptides and amino acids via catabolic pathways in the maternal circulation and infant gastrointestinal tract. It is unlikely to be absorbed by the breastfed infant or adversely affect the infant. No special precautions are required.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Zilucoplan

### CAS Registry Number

1841136-73-9

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complement Inactivating Agents